# Bendroflumethiazide

CASRN: 73-48-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the amount of bendroflumethiazide in breastmilk. Intense diuresis with large doses of bendroflumethiazide can decrease breastmilk production, especially during the neonatal period. Shorter-acting diuretics in low doses are preferred over bendroflumethiazide.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Bendroflumethiazide has been used to suppress lactation in oral doses of 5 mg twice daily for 5 days, and in doses of 10 mg in the morning and 5 mg in the afternoon.[1-3] The added contribution of the diuretic to these measures, which are effective in suppressing lactation, has not been studied. There are no data on the effects of potent diuretics on established, ongoing lactation.

### Alternate Drugs to Consider

Chlorothiazide, Hydrochlorothiazide

### References

1 Healy M. Suppressing lactation with oral diuretics. Lancet 1961;277:1353-4. doi:10.1016/S0140-6736(61)90289-6
2 Stout G. Suppression of lactation. Br Med J 1962;1:1150.18117911
3 Reiher KH. Suppression of lactation by stimulation of diuresis. Zentralbl Gynakol 1963;85:188-90.13973786

## Substance Identification

### Substance Name

Bendroflumethiazide

### CAS Registry Number

73-48-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Thiazide Diuretics